# Telithromycin

CASRN: 191114-48-4

Chemical structure

## Drug Levels and Effects

### Summary of Use during Lactation

Because there is no published experience with telithromycin during breastfeeding, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Azithromycin, Clarithromycin

## Substance Identification

### Substance Name

Telithromycin

### CAS Registry Number

191114-48-4

### Drug Class

- Breast Feeding
- Lactation
- Anti-Infective Agents
- Anti-Bacterial Agents
- Ketolides